# Gallium Citrate Ga 67

CASRN: 41183-64-6

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of Ga 67 citrate as a diagnostic agent. Several international guidelines recommend discontinuation of breastfeeding for 3 to 4 weeks or complete cessation of breastfeeding after intravenous Ga 67 citrate.[1-5] If the mother wishes to resume nursing, the breasts should be emptied regularly and completely during the period of interruption. If the mother has expressed and saved milk prior to the examination, she can feed it to the infant during the period of nursing interruption.[3,6] The milk that is pumped by the mother during the time of breastfeeding interruption can either be discarded or stored frozen and given to the infant after 10 physical half-lives, or about 33 days, have elapsed.[3,6] Note that guidelines are based on theoretical considerations following intravenous administration. One small study indicates that interruption of breastfeeding might not be necessary when Ga 67 citrate is given orally.

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[7] Mothers who receive a dose less than 190 MBq for an inflammation scan need not refrain from close contact with their infants.[8]

### Drug Levels

Ga 67 decays by electron capture with principal photon energies of 93, 185 and 300 keV, and a physical half-life of 3.26 days.[4] The effective half-life of gallium 67 citrate ranges from 40 to 68 hours.[6,7]

A breastfeeding patient provided 5 samples of expressed breastmilk from 8.6 to 93.5 hours after administration of 6.8 MBq 67Ga-citrate orally. Total estimated activity ingested by the infant with no interruption of breastfeeding was 27 kBq resulting in effective dose to a 1-year-old of 33 mSv. Results were compared to a second case from another site, from two breastmilk samples provided at 7.7 hours and 82.3 hours, with good agreement. The investigators felt that the study confirms the dose to a breastfeeding infant is very low after oral administration to the mother, and significantly less than 1 mSv, from 67Ga-citrate ingested for colonic transit studies with no interruption of breastfeeding.[9]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mattsson S, Johansson L, Leide Svegborn S, . Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44 (2 Suppl):7-321.
2 International Atomic Energy Agency. Radiation Protection and Safety in Medical Uses of Ionizing Radiation, IAEA Safety Standards Series No. SSG-46, IAEA, Vienna. 2018 https://www.iaea.org/publications/11102/radiation-protection-and-safety-in-medical-uses-of-ionizing-radiation
3 ARSAC notes for guidance: Good clinical practice in nuclear medicine. Notes for guidance on the clinical administration of radiopharmaceuticals and use of sealed radioactive sources. 2020 https://www.gov.uk/government/publications/arsac-notes-for-guidance
4 Dilsizian V, Metter D, Palestro C, . Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019 https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
5 Stabin MG. Doses from medical radiation sources. https://hps.org/hpspublications/articles/dosesfrommedicalradiation.html. Accessed Nov 6, 2024.
6 Mountford PJ, Coakley AJ. A review of the secretion of radioactivity in human breast milk: Data, quantitative analysis and recommendations. Nucl Med Commun 1989;10:15-27.2645546
7 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203
8 Mountford PJ, O’Doherty MJ. Exposure of critical groups to nuclear medicine patients. Appl Radiat Isot 1999;50:89-111.10028630
9 Carrick D, Bognar J, Skillen A, . Quantification of 67Ga-citrate in breastmilk following oral administration of 67Ga-citrate for colonic transit evaluation. Intern Med J 2026;56 (Suppl 3):36. doi:10.1111/imj.70529

## Substance Identification

### Substance Name

Gallium Citrate Ga 67

### CAS Registry Number

41183-64-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Radiopharmaceuticals

Gallium Radioisotopes

Diagnostic Agents